# Medroxyprogesterone Acetate

CASRN: 71-58-9

## Drug Levels and Effects

### Summary of Use during Lactation

Although nonhormonal methods are preferred during breastfeeding, progestin-only contraceptives such as depot medroxyprogesterone acetate (DMPA) are considered the hormonal contraceptives of choice during all stages of lactation. Fair to moderate quality evidence indicates that DMPA does not adversely affect the composition of milk, the growth and development of the infant, or the milk supply.[1,2] Some evidence indicates that progestin-only contraceptives may offer protection against bone mineral density loss during lactation, or at least do not exacerbate it.[3-5]

The timing of initiation of DMPA is controversial.[6] The product labeling states that it should be started no sooner than 6 weeks postpartum, based on data submitted for product approval; and, starting too soon theoretically could affect the newborn infant adversely because of slower metabolism of the drug than older infants. Studies of fair quality seem to indicate that concerns about immediate adverse effects on the infants is unfounded. Of concern is that no data exist on the effects of progesterone on brain and liver development at this age. A systematic review of studies using early postpartum initiation of DMPA concluded that all of the studies were of low quality and inadequate to disprove the concern about DMPA's effects on milk production if given sooner than 6 weeks after delivery.[7] A subsequent study raised the possibility of a slight reduction in breastfeeding duration in women given DMPA before hospital discharge,[8] and another study found that breastfeeding was less like to be initiated if mothers received immediate postpartum DMPA.[9] Other recent studies of variable quality have found no effect on lactogenesis-II or duration of breastfeeding.

Expert opinion in the United States holds that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1] The World Health Organization recommends that injectable depot medroxyprogesterone acetate should not be used before 6 weeks postpartum.[2]

### Drug Levels

Maternal Levels. Seven women were given a single intramuscular dose of depot medroxyprogesterone acetate 150 mg 1 week after delivery. Peak milk levels occurred at varying times between days 8 to 28 after the injection, with most between 1 and 2 weeks. Peak levels ranged from 1.3 to 2.3 mcg/L. In 3 women, levels were measured 50 to 87 days after the dose and were still detectable in milk in the range of 0.54 to 0.98 mcg/L.[10]

Ten women received a single dose of depot medroxyprogesterone acetate 150 mg at 6 to 7 weeks postpartum. Breastmilk levels were measured weekly for 12 weeks. Average milk levels were highest at 1 week after injection at about 7.5 mcg/L and gradually fell to about 0.5 mcg/L at 12 weeks after the injection. The authors estimated that a breastfed infant would receive 1 to 13 mcg daily at 1 week after injection, 0.2 to 1.5 mcg daily 8 weeks after injection and up to 1 mcg daily at 12 weeks after injection.[11]

Infant Levels. Thirteen male infants whose mothers received 150 mg of medroxyprogesterone acetate intramuscularly at weeks 6 and 18 postpartum were breastfed. Complete 4-hour urine specimens were collected on 20 occasions during maternal treatment, including on the days after the injection known to have high maternal serum levels. No medroxyprogesterone or metabolites were detected by GC-MS assay (lower limit not specified) in the urine of the infants.[12]

### Effects in Breastfed Infants

In a nonrandomized study, 228 women chose depot medroxyprogesterone acetate injection every 3 months as a postpartum contraceptive starting in months 2 to 4 postpartum. Eighty-eight percent of the women breastfed their infants for at least 6 months. Infants were examined during the study and again at age 4.5 years. No adverse effects on infant growth and development were noted in the exposed infants.[13]

One follow-up study of 1215 children whose mothers received depot medroxyprogesterone during nursing reported a delayed appearance of pubic hair (reported by mothers) in pubescent girls, but not boys. No other effects on growth were observed after correction for socioeconomic status.[14]

A multicenter, nonrandomized study followed 541 infants whose mothers received depot medroxyprogesterone acetate injection 150 mg every 3 months for contraception during breastfeeding. No adverse effects on infant growth through the first year were found in comparison to standard measurements.[15,16]

Thirteen male breastfed infants whose mothers received 150 mg of medroxyprogesterone acetate intramuscularly at weeks 6 and 18 postpartum were studied. No differences were found in serum levels of luteinizing hormone, follicle-stimulating hormone, unconjugated testosterone, or cortisol compared to those of a group of 9 control infants.[12]

In a nonrandomized study comparing 190 infants of women using depot medroxyprogesterone to those using a nonhormonal contraceptive or no contraception starting at about day 57 postpartum, no difference in infant growth rates were seen from birth to 6 months of age, regardless of whether the infant was fully or partially breastfed.[17]

In a retrospective cohort study of 270 infants whose mothers were given DMPA postpartum, no effect of DMPA on weight when adjusted for cofounders and no differences between groups in psychomotor development, milestones, health problems, infant height or physical examinations.[18]

A non-blinded, randomized study of exclusively breastfeeding women compared those who received an etonogestrel implant 24-48 hours after delivery (n = 20) to those who received a 150 mg depot medroxyprogesterone acetate injection at 6 weeks postpartum (n = 20). No difference in infant weight gain was noted between the two groups.[19]

One-hundred-fifty mothers were given 150 mg of depot medroxyprogesterone acetate intramuscularly after breastfeeding was established postpartum, but before discharge at 2 to 10 days; a second dose was given at 3 months postpartum. The growth (height and weight) and illnesses of their infants was compared to those of a control group in a case-control study. No difference between the groups was seen at 1.5, 3 and 6 months postpartum. The day postpartum when the injection was given had no effect on the outcome.[20]

### Effects on Lactation and Breastmilk

Galactorrhea has been reported in nonpregnant, nonlactating women using depot medroxyprogesterone acetate (DMPA). In one case series, 3.6% of 360 adolescents who used depot medroxyprogesterone acetate as a contraceptive for at least 6 months developed galactorrhea with normal prolactin levels.[25]

Numerous studies found that the use of intramuscular depot medroxyprogesterone acetate as a contraceptive beginning at 7 days postpartum or later either has no negative effect or causes increases in the milk supply, duration of lactation or quality of breastmilk.[13,15,17,18,21-28] However, most of these were so seriously flawed that no valid conclusion can be drawn on the effect of early initiation on breastfeeding duration.[7]

Twenty-five women who were 6 weeks postpartum were given a single injection of 150 mg of depot medroxyprogesterone acetate. Serum prolactin levels were compared to those of 25 women who used an IUD. All women breastfed their infants to about the same extent. Basal serum prolactin levels were similar between the groups at the beginning of the study. These levels slowly decreased in the IUD group, but increased in the medroxyprogesterone group. The differences were statistically significant at 6 weeks after the start of the study. Basal prolactin increases in the medroxyprogesterone were 14% over baseline and 59% over the IUD group at 6 weeks.[29]

Women (n = 80) were assigned randomly to receive intramuscular depot medroxyprogesterone acetate (DMPA) 250 mg 1 to 2 days postpartum. Other women in the study (n = 616) were started on DMPA at 30 days postpartum. The median duration of lactation in both groups was longer in these women than the lactation duration following previous births.[30]

A nonrandomized, nonblinded study compared women who received either nonhormonal contraception (n = 56) or depot medroxyprogesterone acetate (n = 47) 150 mg intramuscularly upon discharge from the hospital. No statistical differences were found in the breastfeeding rates or percentage of women exclusively breastfeeding between the 2 groups of women at 1, 4, 8, 12 or 16 weeks postpartum.[31]

In a nonrandomized, nonblinded study comparing women who were breastfeeding at discharge, 102 postpartum women received depot medroxyprogesterone acetate (dosage not stated) in the early postpartum period (average 51.9 hours postpartum; range 6.25 to 132 hours), 181 received another progestin-only contraceptive and 138 used nonhormonal contraception. No differences in breastfeeding rates were seen at 2 and 6 weeks, but women receiving any hormonal contraceptive were breastfeeding at a lower rate (72.1% vs 77.6%) at 4 weeks postpartum. The authors concluded that progestin-only contraception initiated in the early postpartum period had no adverse effects on breastfeeding rates.[32]

A survey of 183 women who delivered in one hospital compared those who received DMPA after delivery and prior to discharge (n = 68) to those who did not receive the treatment (n = 115). There was a slight, but not statistically significant reduction in the duration of lactation among the mothers who received the early DMPA.[8]

One-hundred-fifty mothers were given 150 mg of depot medroxyprogesterone acetate intramuscularly after breastfeeding was established postpartum, but before discharge at 2 to 10 days; a second dose was given at 3 months postpartum. In a case-control study these mothers were compared to a control group of women receiving no postpartum contraception. No difference was found between the groups in the number of nursings per day over the 6-month follow-up period, nor was there a difference in patient satisfaction in multiparous mothers compared to previous breastfeeding experience(s).[20]

Women who delivered at two teaching hospitals in South Africa were randomized to receive either DMPA or an IUD within 48 hours of childbirth. There were no differences in exclusive or partial breastfeeding rates between the DMPA and IUD users at baseline or at 1 and 3 months postpartum.[33]

A secondary analysis of a study on postpartum mothers analyzed mothers who did (n = 29) or did not (n = 141) receive depot medroxyprogesterone after delivering an infant of 32 weeks or less of gestational age and weighing 1500 grams or less. The analysis found a slight delay secretory activation, but no differences in milk production on days 1–7, 14, or 21 or on duration of lactation between the two groups.[34]

A study in India provided depot medroxyprogesterone to women during the first week postpartum after lactation was established. Of the 180 women studied, only 2 reported having any breastfeeding difficulties, including amount of milk and frequency of nursing.[35]

A multicenter study compared women in the US with normal full-term deliveries who were given depot medroxyprogesterone acetate (n = 55) within 48 hours of delivery and either placebo or no injection (n = 95). The time to lactogenesis stage 2 did not differ significantly between the two groups.[36]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Intrauterine Levonorgestrel, Levonorgestrel Implant, Oral Levonorgestrel, Progesterone

### References

1 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1–126.39106314
2 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
3 Caird LE, Reid-Thomas V, Hannan WJ, et al. Oral progestogen-only contraception may protect against loss of bone mass in breast-feeding women. Clin Endocrinol (Oxf) 1994;41:739–45.7889609
4 Díaz S, Reyes MV, Zepeda A, et al. Norplant((R)) implants and progesterone vaginal rings do not affect maternal bone turnover and density during lactation and after weaning. Hum Reprod 1999;14:2499–505.10527977
5 Costa ML, Cecatti JG, Krupa FG, et al. Progestin-only contraception prevents bone loss in postpartum breastfeeding women. Contraception 2012;85:374–80.22036473
6 Rodríguez MI, Kaunitz AM. An evidence-based approach to postpartum use of depot medroxyprogesterone acetate in breastfeeding women. Contraception 2009;80:4–6.19501209
7 Brownell EA, Fernández ID, Howard CR, et al. A systematic review of early postpartum medroxyprogesterone receipt and early breastfeeding cessation: Evaluating the methodological rigor of the evidence. Breastfeed Med 2012;7:10–8.22085201
8 Brownell EA, Fernández ID, Fisher SG, et al. The effect of immediate postpartum depot medroxyprogesterone on early breastfeeding cessation. Contraception 2013;87:836–43.23153897
9 Chen D, Fuell Wysong, E, Li H, et al. Association of postpartum predischarge depot-medroxyprogesterone acetate with in-hospital breastfeeding initiation. Breastfeed Med 2016;11:519–25.27782765
10 Saxena BN, Shrimanker K, Grudzinskas JG. Levels of contraceptive steroids in breast milk and plasma of lactating women. Contraception 1977;16:605–13.606500
11 Koetsawang S, Nukulkarn P, Fotherby K, et al. Transfer of contraceptive steroids in milk of women using long-acting gestagens. Contraception 1982;25:321–31.6213373
12 Virutamasen P, Leepipatpaiboon S, Kriengsinyot R, et al. Pharmacodynamic effects of depot-medroxyprogesterone acetate (DMPA) administered to lactating women on their male infants. Contraception 1996;54:153–7.8899256
13 Zacharias S, Aguilera E, Assenzo JR, et al. Effects of hormonal and nonhormonal contraceptives on lactation and incidence of pregnancy. Contraception 1986;33:203–13.2941236
14 Pardthaisong T, Yenchit C, Gray R. The long-term growth and development of children exposed to Depo-Provera during pregnancy or lactation. Contraception 1992;45:313–24.1387602
15 Anon. Progestogen-only contraceptives during lactation: I. Infant growth. World Health Organization Task force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development and Research Training in Human Reproduction. Contraception 1994;50:35–53.7924321
16 Anon. Progestogen-only contraceptives during lactation: II. Infant development. World Health Organization, Task Force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development, and Research Training in Human Reproduction. Contraception 1994;50:55–68.7924322
17 Díaz S, Zepeda A, Maturana X, et al. Fertility regulation in nursing women IX. Contraceptive performance, duration of lactation, infant gowth, and bleeding patterns during use of progesterone vaginal rings, progestin-only pills, Norplant® implants, and Copper T 380-A intrauterine devices. Contraception 1997;56:223–32.9408703
18 Jimenez J, Ochoa M, Soler MP, et al. Long-term follow-up of children breast-fed by mothers receiving depot-medroxyprogesterone acetate. Contraception 1984;30:523–33.6241560
19 Brito MB, Ferriani RA, Quintana SM, et al. Safety of the etonogestrel-releasing implant during the immediate postpartum period: a pilot study. Contraception 2009;80:519–26.19913145
20 Singhal S, Sarda N, Gupta S, et al. Impact of injectable progestogen contraception in early puerperium on lactation and infant health. J Clin Diagn Res 2014;8:69–72.24783085
21 Omar HA, Zakharia RM, Kanungo S, et al. Incidence of galactorrhea in young women using depot-medroxyprogesterone acetate. ScientificWorldJournal 2006;6:538–41.16680366
22 Karim M, Ammar R, El Mahgoub, S, et al. Injected progestogen and lactation. Br Med J 1971;1:200–3.5099971
23 Zañartu J, Aguilera E, Muñoz G, et al. Effect of a long-acting contraceptive progestogen on lactation. Obstet Gynecol 1976;47:174–6.943074
24 Toddywalla VS, Joshi L, Virkar K. Effect of contraceptive steroids on human lactation. Am J Obstet Gynecol 1977;127:245–9.835620
25 Dahlberg K. Some effects of depo-medroxyprogesterone acetate (DMPA): Observations in the nursing infant and in the long-term user. Int J Gynaecol Obstet 1982;20:43–8.6126406
26 Zacharias S, Aguilera E, Jimenez J, et al. The effects of hormonal and non-hormonal contraceptives on human lactation and on the re-establishment of fertility. Int J Gynaecol Obstet 1987;25 (Suppl):249–55.2892718
27 Anon. Effects of hormonal contraceptives on breast milk composition and infant growth. World Health Organization (WHO) Task Force on Oral Contraceptives. Stud Fam Plann 1988;19:361–9.2906764
28 Baheiraei A, Ardsetani N, Ghazizadeh S. Effects of progestogen-only contraceptives on breast-feeding and infant growth. Int J Gynaecol Obstet 2001;74:203–5.11502302
29 Ratchanon S, Taneepanichskul S. Depot medroxyprogesterone acetate and basal serum prolactin levels in lactating women. Obstet Gynecol 2000;96:926–8.11084179
30 Guiloff E, Ibarra-Polo A, Zanartu J, et al. Effect of contraception on lactation. Am J Obstet Gynecol 1974;118:42–5.4128673
31 Hannon PR, Duggan AK, Serwint JR, et al. The influence of medroxyprogesterone on the duration of breast-feeding in mothers in an urban community. Arch Pediatr Adolesc Med 1997;151:490–6.9158442
32 Halderman LD, Nelson AL. Impact of early postpartum administration of progestin-only hormonal contraceptives compared with nonhormonal contraceptives on short-term breast-feeding patterns. Am J Obstet Gynecol 2002;186:1250–6.12066106
33 Singata-Madliki M, Hofmeyr GJ, Lawrie TA. The effect of depot medroxyprogesterone acetate on postnatal depression: A randomised controlled trial. J Fam Plann Reprod Health Care 2016;42:171–6.27030698
34 Parker LA, Sullivan S, Cacho N, et al. Effect of postpartum depo medroxyprogesterone acetate on lactation in mothers of very low-birth-weight infants. Breastfeed Med 2021;16:835–42.33913765
35 Garg SS, Bhateja B, Grover S, et al. Injection depot medroxyprogesterone acetate as an early postpartum contraceptive measure: Evaluation of its acceptability, efficacy, and impact on lactation. Cureus 2024;16:e66454. doi:10.7759/cureus.66454 39246969
36 Gallo MF, Schumacher FL, Lawley M, et al. Potential effect of immediate postpartum use of injectable contraception on lactogenesis. Contraception 2025;142:110726.39424123

## Substance Identification

### Substance Name

Medroxyprogesterone Acetate

### CAS Registry Number

71-58-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic

Hormones

Progesterone Congeners